# Aspartame

CASRN: 22839-47-0

## Drug Levels and Effects

### Summary of Use during Lactation

Aspartame is not detectable in breastmilk after maternal ingestion because it is rapidly broken down in the mother's body. An extremely large intake of aspartame (equivalent to 17 cans of soda or 100 packets of Equal Sweetener) can slightly increase the amount of phenylalanine in breastmilk. Phenylalanine concentrations in milk return to baseline by 12 hours after a large single dose of aspartame. Although it is prudent to avoid the use of aspartame in women who are nursing an infant with phenylketonuria, amounts that are typically ingested in aspartame-sweetened foods and beverages do not result in any additional risk to breastfed infants with phenylketonuria. Ingestion of diet drinks containing low-calorie sweeteners might increase the risk of vomiting in breastfed infants. An association between low-calorie sweeteners, and especially aspartame, and the risk of autism in boys has been found, but more data are needed to establish a cause-and-effect relationship.

### Drug Levels

Aspartame is rapidly metabolized in the body to 2 amino acids that occur naturally in breastmilk, aspartic acid and phenylalanine and methanol.

Maternal Levels. Six lactating women an average of 98 days postpartum (range 42 to 159 days) were given aspartame or lactose orally in a dose of 50 mg/kg (equivalent to 17 aspartame-sweetened sodas or 100 packets of Equal in a 68 kg [150 lb.] adult[1]) on 2 separate occasions 2 weeks apart in a randomized crossover trial. Breastmilk samples were collected over the next 24 hours. Breastmilk phenylalanine levels increased to a maximum of about 6 mg/L between 1 and 8 hours after the dose of aspartame and returned to baseline by about 12 hours after the dose. Lactose had no effect on breastmilk phenylalanine levels. Aspartame was not detected (<1.4 mg/L) in breastmilk at any time. The authors calculated that if the milk phenylalanine concentration were elevated for 24 hours to the maximum found in this study, a fully breastfed infant would receive an additional 0.5 mg/kg daily above the normal intake of 79 mg/kg of phenylalanine that occurs naturally in breastmilk.[2]

Twenty lactating women completed background questionnaires about breastfeeding and the intake of nonnutritive sweeteners in the prior 24 hours. Each then donated a milk sample that was analyzed for the presence of nonnutritive sweeteners. Sweetener intake was primarily from diet sodas and sweetener packets. Of the 14 women who reported intake of a nonnutritive sweetener, none had quantifiable levels of aspartame in their breastmilk.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cross-sectional survey assessed the dietary history of US mothers nursing infants between 11 and 15 weeks of age. The survey was used to estimate the amount of diet soda and fruit drinks consumed by the women. There were no statistically significant differences in infants’ weight or z-scores based on low calorie sweetener exposure. However, infants exposed to low calorie sweetener in milk once or less per week had a statistically significantly higher risk of vomiting than those who were not exposed. Greater exposure was not associated with vomiting. It was not possible to assess the effects of specific sweeteners.[4]

A retrospective dietary recall study compared the use of diet soda and aspartame during pregnancy and/or lactation to the risk of autism in the children. Among boys, autism was associated with three times the likelihood of exposure to aspartame. No statistically significant associations were found in girls.[5] The contribution of exposure during breastfeeding was not separated from the risk of exposure during pregnancy, and intact aspartame is usually not found in milk, so breastmilk exposure cannot be claimed to cause autism based on these data. The authors propose that the methanol metabolite might have an impact on infants.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Franz M. Is it safe to consume aspartame during pregnancy? A review. Nutrition update. Diabetes Educ 1986;12:145-7.3634700
2 Stegink LD, Filer LJ, Jr, Baker GL. Plasma, erythrocyte and human milk levels of free amino acids in lactating women administered aspartame or lactose. J Nutr 1979;109:2173-81.512705
3 Sylvetsky AC, Gardner AL, Bauman V, et al. Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A 2015;78:1029-32.26267522
4 Huang Q, Murphy J, Smith ER, Sylvetsky AC. Diet beverage intake during lactation and associations with infant outcomes in the infant feeding practices study II. Nutrients 2021;13:3154.34579031
5 Fowler SP, Gimeno Ruiz de Porras D, Swartz MD, et al. Daily early-life exposures to diet soda and aspartame are associated with autism in males: A case-control study. Nutrients 2023;15:3772.37686804

## Substance Identification

### Substance Name

Aspartame

### CAS Registry Number

22839-47-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Artificial Sweeteners

Sweetening Agents